# Tirzepatide

CASRN: 2023788-19-2

## Drug Levels and Effects

### Summary of Use during Lactation

Tirzepatide is usually undetectable in breastmilk with subcutaneous doses of up to 5 mg. Furthermore, absorption by the infant is unlikely because it is probably partially destroyed in the infant’s gastrointestinal tract and poorly absorbed orally. If a mother requires tirzepatide, it is not a reason to discontinue breastfeeding. Until more data become available, tirzepatide should be used with caution during breastfeeding, especially while nursing a newborn or preterm infant. Some experts recommend closely monitoring of infant growth and developmental milestones and the nutritional status of the lactating woman.[1]

### Drug Levels

Maternal Levels. The manufacturer reports a study of 11 lactating women who were given a single 5 mg subcutaneous dose of tirzepatide. The concentration of tirzepatide in breastmilk was undetectable (<4 mcg/L) in 164 of 171 milk samples. The cumulative amount of tirzepatide detected in the remaining 7 breastmilk samples over the 28-day sampling period was equivalent to less than 0.02% of the maternal administered dose, with the last measurable concentrations occurring 5 days after the dose. This study does not account for accumulation that would occur during typical use, so the amounts in milk at steady-state are probably greater than indicated.

Five women who were receiving subcutaneous tirzepatide in doses of 2.5 to 5 mg per week collected milk samples multiple times on the day they received their drug dose, and one woman collected a sample 168 hours after her dose. A few samples found unquantifiable milk levels below the limit of detection of 0.7 mcg/L and no samples exceeded the limit of quantification of 2.38 mcg/L.[2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Five women who were receiving tirzepatide in doses of 2.5 to 5 mg per week. All mothers continued breastfeeding to varying extents, but none reported observed adverse effects in their infants attributable to tirzepatide.[2]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Diabetes) Acarbose, Glipizide, Glyburide, Insulin, Metformin, Miglitol, Semaglutide; (Weight Loss) Semaglutide

### References

1 Maslin K, Shawe J, Blowers S, . Incretin-based medications in women and reproduction: A systematic scoping review and consensus guidelines for clinical practice. Obes Rev 2026:e70203.
2 Thompson J, Diab H, Datta P, . Tirzepatide (Zepbound) in human milk during periods of maternal dosing. Preprint submitted to J Chromatogr B 2025 doi:10.2139/ssrn.5387250

## Substance Identification

### Substance Name

Tirzepatide

### CAS Registry Number

2023788-19-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Hypoglycemic Agents

Incretins

Glucagon-Like Peptide-1 Agonists

GLP-1 Agonists